# Amenamevir

CASRN: 841301-32-4

## Drug Levels and Effects

### Summary of Use during Lactation

Amenamevir is not marketed in the United States. A study in two patients found that amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. If the mother requires amenamevir, it is not a reason to discontinue breastfeeding. However, until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A single dose of 1200 mg of amenamevir was prescribed to two women who were instructed to carry it with them and take the tablets after a meal within 6 hours of recognizing prodromal symptoms of herpes. Milk samples were collected at several time points up to 48 hours after the dose. The maximum milk concentrations were 400 mcg/L at 3.5 hours after the dose and 1390 mcg/L at 4.17 hours after the dose in the other. The average milk amenamevir concentration in one patient was 508.3 mcg/L. The other patient missed some collections, and the average concentration could not be calculated. The RID, calculated using the average concentration in one patient was 0.337%. The worst-case RID calculated using observed maximum concentrations were 0.303% and 0.923%.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acyclovir, Valacyclovir

### References

1 Koinuma S, Goto M, Saito J, . Amenamevir transfer into breast milk in patients with herpes simplex virus infection: A brief report of a prospective multicenter study. J Dermatol 2026

## Substance Identification

### Substance Name

Amenamevir

### CAS Registry Number

841301-32-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents